# Miglustat

CASRN: 72599-27-0

## Drug Levels and Effects

### Summary of Use during Lactation

No published experience exists with miglustat during breastfeeding. Because of the lack of information and its side effect profile, most sources, including the manufacturer, consider breastfeeding to be contraindicated during maternal miglustat therapy.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Alglucerase, Imiglucerase, Taliglucerase Alfa

### References

1 Calderón E, Rodríguez-Fernández A, Calderón-Baturone I, . Spanish consensus on managing pregnancy in women with Gaucher disease. Orphanet J Rare Dis 2025;20:146.40155919

## Substance Identification

### Substance Name

Miglustat

### CAS Registry Number

72599-27-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Glycoside Hydrolase Inhibitors